# Dornase Alfa

CASRN: 143831-71-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dornase alpha (hamster) during breastfeeding. Because it is given by inhalation and is a large protein molecule with a molecular weight of about 37,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. A task force respiratory experts from Europe, Australia and New Zealand found that dornase alfa is compatible with breastfeeding.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837

## Substance Identification

### Substance Name

Dornase Alfa

### CAS Registry Number

143831-71-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Deoxyribonuclease I